# Indacaterol

CASRN: 312753-06-3

## Drug Levels and Effects

### Summary of Use during Lactation

Indacaterol is no longer marketed in the US. Although no published data exist on the use of indacaterol by mouth or inhaler during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews and expert guidelines agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Formoterol, Salmeterol

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91.6586490
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8.11254828
4 Taddio A, Ito S. Drugs and breast-feeding. In, Koren G, ed. Maternal-fetal toxicology. A clinician's guide. 3rd ed. New York. Marcel Dekker. 2001:177-32.
5 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62.38513758

## Substance Identification

### Substance Name

Indacaterol

### CAS Registry Number

312753-06-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Beta Adrenergic Agonists

Bronchodilator Agents